# Methyldopa

CASRN: 555-30-6

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of methyldopa in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants. No special precautions are required.

### Drug Levels

Maternal Levels. Three women who were 2 to 15 days postpartum were taking 250 mg of methyldopa orally 3 or 4 times daily. Randomly drawn milk samples had levels of drug and conjugate that ranged from < 0.1 to 0.5 mg/L at a dose of 750 mg daily and were 0.8 mg/L at a dose of 1 gram daily.[1]

In 3 women who were 1 to 8 weeks postpartum, peak levels of drug and conjugate occurred between 3 and 6 hours after the dose. Peak levels of drug and conjugate after a dose of 500 mg were 0.2, 0.66 and 1.14 mg/L in 3 mothers' milk. The authors estimated an infant dosage of less than 0.2% of the mother's total dosage.[2]

Infant Levels. No methyldopa was detectable (<200 mcg/L) in the serum of an infant whose mother was taking methyldopa 250 mg twice daily. The infant's urine contained a methyldopa concentration of 3.8 mg/L.[3]

In an 8-week-old infant whose mother was receiving 1 gram daily of methyldopa, a serum level of 90 mcg/L was found 10 hours after a 500 mg maternal dose. Another 1-week-old infant whose mother was receiving 500 mg daily had no detectable drug in the serum (<50 mcg/L).[2]

### Effects in Breastfed Infants

No acute or long-term adverse effects were reported in any 15 infants ranging in age from less than 1 week to 8 weeks of age whose mothers were taking oral methyldopa 0.25 to 1.5 grams daily.[1-4]

### Effects on Lactation and Breastmilk

Methyldopa can increase serum prolactin and has caused galactorrhea.[5-8] The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Candesartan, Benazepril, Captopril, Enalapril, Lisinopril, Quinapril, Hydrochlorothiazide, Methyldopa, Propranolol

### References

1 Jones HM, Cummings AJ. A study of the transfer of alpha-methyldopa to the human foetus and newborn infant. Br J Clin Pharmacol 1978;6:432-4 728288
2 White WB, Andreoli JW, Cohn RD. Alpha-methyldopa disposition in mothers with hypertension and in their breast-fed infants. Clin Pharmacol Ther 1985;37:387-90 3838502
3 Hauser GJ, Almog S, Tirosh M, et al. Effect of alpha-methyldopa excreted in human milk on the breast-fed infant. Helv Paediatr Acta 1985;40:83-6 3843238
4 Hoskins JA, Holliday SB. Determination of alpha-methyldopa and methyldopate in human breast milk and plasma by ion-exchange chromatography using electrochemical detection. J Chromatogr 1982;230:162-7 7202013
5 Arze RS, Ramos JM, Rashid HU, et al. Amenorrhoea, galactorrhoea, and hyperprolactinaemia induced by methyldopa. Br Med J 1981;283:194 6789964
6 Turkington RW. Prolactin secretion in patients treated with various drugs: Phenothiazines, tricyclic antidepressants, reserpine, and methyldopa. Arch Intern Med 1972;130:349-54 4560178
7 Vaidya RA, Vaidya AB, Van Woert MH, et al. Galactorrhea and Parkinson-like syndrome: An adverse effect of alpha-methyldopa. Metabolism 1970;19:1068-70 4923681
8 Cohen MA, Davies PH. Drug therapy and hyperprolactinaemia. Adv Drug React Bull 1998:723-6

## Substance Identification

### Substance Name

Methyldopa

### CAS Registry Number

555-30-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Adrenergic alpha-2 Receptor Agonists